# Luliconazole

CASRN: 187164-19-8

## Drug Levels and Effects

### Summary of Use during Lactation

Topical luliconazole has not been studied during breastfeeding. Because it is poorly absorbed after topical use and is highly plasma protein bound, it is a low risk to the nursing infant. Avoid application to the nipple area and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.

## Substance Identification

### Substance Name

Luliconazole

### CAS Registry Number

187164-19-8

### Drug Class

Breast Feeding

Lactation

Antifungal Agents

Anti-Infective Agents